# Omalizumab

CASRN: 242138-07-4

## Drug Levels and Effects

### Summary of Use during Lactation

Preliminary evidence indicates that the amount of omalizumab in milk is very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[1] Many infants have been breastfed during maternal omalizumab therapy, with no increase in infectious complications. Omalizumab is considered acceptable to use during breastfeeding.[2-5] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[6]

### Drug Levels

Maternal Levels. A woman received omalizumab 5 weekly doses of omalizumab 150 mg subcutaneously during pregnancy until 28 weeks of gestation. Breastmilk omalizumab levels were determined on days 4 and 5 postpartum, which were 85 and 86 days after the last dose of omalizumab. Four concentrations in milk were below 2 mcg/L and one was just over 8 mcg/L.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A manufacturer-based omalizumab pregnancy registry has followed pregnant and nursing mothers for several years. Of 230 infants followed, 154 were breastfed while their mothers were taking omalizumab. Another 32 were breastfed without being exposed to the drug in milk and 44 were not breastfed. No difference in serious adverse events were seen among the three groups of infants. Infections occurred at a similar rate in all groups.[8]

Several case reports of infants being breastfed during maternal omalizumab therapy have been published. No adverse effects have been found.[9-13]

A woman with cystic fibrosis and severe, persistent asthma was started on omalizumab 600 mg subcutaneously every 2 weeks. She was maintained on this regimen for 5 years when she became pregnant. The regimen was continued during pregnancy and postpartum. She breastfed (extent not stated) for 8 months. At 10 months of age, her infant was in good health.[14]

A retrospective study in a hospital in China found 5 infants who were breastfed during maternal omalizumab use at a dosage of 150 to 300 mg every 4 weeks. No adverse effects were seen in the infants. [15]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Asthma) Benralizumab, Mepolizumab

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3 33956488
2 Türk M, Carneiro-Leao L, Kolkhir P, et al. How to treat patients with chronic spontaneous urticaria with omalizumab: Questions and answers. J Allergy Clin Immunol Pract 2020;8:113-24 31374358
3 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208 31699837
4 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758
5 Naftel J, Jackson DJ, Coleman M, et al. An international consensus on the use of asthma biologics in pregnancy. Lancet Respir Med 2024 39216499
6 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66 36931808
7 Saito J, Yakuwa N, Sandaiji N, et al. Omalizumab concentrations in pregnancy and lactation: A case study. J Allergy Clin Immunol Pract 2020;8:3603-4 32544544
8 López Leon, S, Kaufman DG, Howard M, et al. Safety outcomes among infants exposed to omalizumab via breastfeeding: Results from the Xolair Pregnancy Registry (Expect). Pharmacoepidemiol Drug Saf 2019;28 (Suppl 2):374-5. doi:10.1002/pds.4864
9 Ensina LF, Cusato-Ensina AP, Camelo-Nunes IC, et al. Omalizumab as third-line therapy for urticaria during pregnancy. J Investig Allergol Clin Immunol 2017;27:326-7 29057743
10 González-Medina M, Curto-Barredo L, Labrador-Horrillo M, et al. Omalizumab use during pregnancy for chronic spontaneous urticaria (CSU): Report of two cases. J Eur Acad Dermatol Venereol 2017;31:e245-6 27868240
11 Losappio LM, Mirone C, Schroeder JW, et al. Omalizumab use in chronic spontaneous urticaria during pregnancy and a four years' follow-up: A case report. Case Rep Dermatol 2020;12:174-7 33173477
12 Majou D, Moreira B, Martin C, et al. Safety of omalizumab during pregnancy and breast-feeding with assessment of placental transfer: A case report. Allergy Asthma Immunol Res 2021;13:515-6 33733644
13 Liao SL, Yu M, Zhao ZT, et al. Case report: Omalizumab for chronic spontaneous urticaria in pregnancy. Front Immunol 2021;12:652973 33796115
14 Riberi L, Pizzimenti S, Riccardi E, et al. Beneficial effects and safety of omalizumab during pregnancy in a patient with cystic fibrosis. J Cyst Fibros 2022;21:S91. doi:10.1016/S1569-1993(22)00433-7
15 Zhao M, Xiao M, Zhang X, et al. Omalizumab for the treatment of eight patients with chronic spontaneous urticaria during pregnancy and lactation. Chinese Journal of Dermatology 2025;58:536-9.doi:10.35541/cjd.20240729

## Substance Identification

### Substance Name

Omalizumab

### CAS Registry Number

242138-07-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Allergic Agents

Anti-Asthmatic Agents

Antibodies, Monoclonal

Antibodies, Anti-Idiotypic